# Reflexology

## Drug Levels and Effects

### Summary of Use during Lactation

Foot reflexology is a system of applying pressure to the feet at specific points on the feet that are supposed to reflect other areas and organs in the body. Studies have been single-blinded (only the mother), and the frequency of application has ranged from multiple times a day to once a week. The specific points that were stimulated and the endpoints of the studies also varied.

Given the above limitations, small studies have found that foot reflexology may increase the early milk volumes and possibly total protein and calcium in mothers of preterm infants. Studies in mothers with cesarean section deliveries found that it may increase infant weight gain and hasten the return to birth weight, increase breastfeeding efficacy, and improve lactation status. A meta-analysis of 3 studies found that foot reflexology had positive effects on the LATCH score, the visual analogue scale for breast tension, postpartum comfort, and breastfeeding satisfaction scores.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Nursing mothers who had not initiated breastfeeding and had premature infants aged 7 to 54 days and gestational age of 28 to 34 weeks, were randomly assigned into two groups (n = 37 in each). In both groups, foot massage was done once daily for seven days, 10 minutes for each foot including general massage of foot soles for the first 5 minutes. For the second 5 minutes, massage was for breast, pituitary and solar plexus related areas in the intervention group and for unrelated areas in the control group. A trained person did the massage on the first day, then taught the mothers to perform the massage. Outcomes were assessed in all mothers on days 1, 4 and 7 following intervention. The findings showed significantly greater increase in the amount of milk supply and lower formula intake by the infants in the reflexology group who received pressure on the breast-related points on the feet for 7 days compared with the control group who received pressure on unrelated points. Also, there was a lower increase in the formula volume intake in the first, fourth and seventh days in the intervention group compared with the control group. Scores of depression, stress and anxiety were not statistically different between the groups.[1]

Mothers undergoing cesarean section and having an infant with a gestational age of 29 to 36 weeks admitted to the NICU had reflexology performed on each foot for 20 minutes in the intervention group (n = 25). The control mothers had normal lactation training (n = 25). Milk volume extracted with an electric breast pump at 11 am each day was compared between the groups on a per-protocol basis. Mothers who received reflexology had greater milk volumes on day 1 through 5, but not on day 6 of the study.[2]

Eighty lactating mothers during the first to fifth days after delivery who had breast engorgement were divided into two groups of foot reflexology once a day for 3 days and routine care. The mean severity of pain after the intervention decreased in both reflexology and control groups, but significantly decreased to a greater extent in the reflexology group than in the control group.[3]

Sixty mothers who received a caesarean section were divided into two groups, 30 who received reflexology and 30 who received routine care. On the 4th day, more of the mothers in the reflexology group had adequate milk secretion compared to initial values.[4]

A randomized study was performed on mothers having a cesarean section. The participants were selected using convenience sampling, and then randomly allocated to three groups of foot reflexology, Benson relaxation, or control (n = 45 per group). For reflexology, the reflex points (pituitary gland, solar plexus, and uterine) were massaged for 10 minutes by applying constant or rotational pressure (20 minutes for both feet). The interventions were performed two hours post-operatively and six hours after the first intervention. The mean pain scores significantly decreased after the intervention in the reflexology and Benson relaxation groups in both the first and second interventions. The difference between the infants’ 10-day weight and birth weight was positive in the two intervention groups and negative in the control group. Also, the rate of return to the birth weight ten days postpartum was significantly greater in the two intervention groups than in the control group.[5]

A randomized trial compared postpartum women who received foot reflexology (n = 45) to routine care only (n = 45). The reflexology group received routine care application of pressure with the thumb and index finger using acupressure thumb on the big toe of each foot for 10 minutes each with a rest interval of 5 minutes in between each session. This was done twice a day for 3 consecutive days. There was statistically significant difference found on all the parameters of the infant breastfeeding assessment tool developed for the study among experimental group.[6]

A single-blind, randomized clinical trial was conducted on primiparous mothers whose premature infants up to 34 weeks were hospitalized in the neonatal intensive care unit. Mothers were randomized to reflexology (n = 37) or control (n = 37). Mothers in the intervention group received foot reflexology for 20 minutes (ten minutes per foot) for seven consecutive days every morning. It is unclear what, if any, intervention the control group received. On the first and seventh days of the study, groups were compared with respect to of milk volume, triglycerides, cholesterol, albumin, total protein, and calcium. Foot reflexology massage showed a trend towards increasing the volume of breastmilk, total protein and calcium, although it was not statistically significant.[7]

A single-blind study of primiparous women who gave birth by cesarean section compared those who received foot reflexology 40 minutes once a week (n = 40) to the control group (n = 40) assigned to rest for 40 minutes a week for 8 weeks. Pain scores in the reflexology group decreased by 91% in week 1, 90% in week 2, and 60% in week 3 compared to the control group. Pain resolved at week 4 in the reflexology group and week 7 in the control group. The reflexology group showed a 37% decrease in fatigue level, a 48% increase in energy level, a 71% increase in sleep quality, and a 20% increase in breastfeeding efficacy compared to the control group. These effects persisted to week 8 postpartum.[8]

A single-blind study in primiparous women giving birth by cesarean section randomly assigned women to receive foot reflexology (n = 40) or routine postnatal care (n = 40). Reflexology consisted of massage of the entire foot using thumb and finger techniques, giving hard but gentle pressure to specific reflex areas for 10 minutes twice daily for the first 3 days postpartum. On the 3rd day postpartum following six sessions of foot reflexology among the experimental group, the LATCH and VAS scales were administered to both groups. The experimental group showed a significant improvement in lactation status, with mean scores increasing from 4.73 to 8.68, compared to 4.28 to 6.75 in the control group. Post-intervention mean pain scores were lower in the experimental group (4.75) compared to the control group (7.65), that also achieved statistical significance.[9]

A meta-analysis was performed on 3 studies that examined the impact of foot reflexology on postpartum comfort and breastfeeding outcomes in postpartum women. Foot reflexology had positive effects on the LATCH score, the visual analogue scale for breast tension, postpartum comfort, and breastfeeding satisfaction scores.[10]

A single-blind, randomized study assigned primiparous mothers who underwent a cesarean section delivery to receive either foot reflexology (n = 40) or routine care only (n = 40). Reflexology was performed once a week for 8 weeks. The first session was performed in the hospital, and the other seven sessions at home. Each session lasted 40 minutes, 20 minutes for each foot. Pain, fatigue, sleep quality, and breastfeeding were assessed weekly for 8 weeks. Pain scores in the reflexology group decreased by 90.9% in week 1, 90.2% in week 2, and 59.8% in week 3 compared to the control group. Pain resolved at week 4 in the reflexology group and week 7 in the control group. The reflexology group showed a 36.9% decrease in fatigue level, a 48.0% increase in energy level, a 70.7% increase in sleep quality, and a 20.2% increase in breastfeeding efficacy compared to the control group.[11]

### References

1 Mirzaie P, Mohammad-Alizadeh-Charandabi S, Goljarian S, . The effect of foot reflexology massage on breast milk volume of mothers with premature infants: A randomized controlled trial. Eur J Integr Med 2018;17:72-8. doi:10.1016/j.eujim.2017.11.010
2 Mohammadpour A, Valiani M, Sadeghnia A, . Investigating the effect of reflexology on the breast milk volume of preterm infants’ mothers. Iran J Nurs Midwifery Res 2018;23:371-5.30186342
3 Mousavi F, Golmakani N, Bahrami H, . The effect of reflexology on the severity of pain due to breast congestion in lactating mothers. Iranian Journal of Obstetrics, Gynecology and Infertility 2020;22:49-55. doi:10.22038/IJOGI.2020.14953
4 Archana R, Padma Priya D, Kalabharathi S. Effect of reflexology on milk secretion among postnatal mothers who had undergone caesarean section. BMC Proceedings 2020;14 (Suppl 7):Abstract-351. doi:10.1186/s12919-020-00190-4
5 Tavallali F, Vahedparast H, Hajinezhad F, . Effect of foot reflexology and Benson relaxation on pain, breastfeeding and weight of neonates of women undergoing a cesarean section. Arch Iran Med 2023;26:381-8.38301097
6 Machhi N, Tiwari A. Effect of foot reflexology on lactation. Indian J Public Health Res Dev 2020;11:224-6. https://www.ijphrd.com/scripts/IJPHRD%20April_2020%20Combined%20File.pdf
7 Nodehi FN, Aziznejadroshan P, Nikbakht HA, . The effect of foot reflexology on the volume and composition of breast milk in mothers of premature infants hospitalized in the neonatal intensive care unit: A randomized controlled trial. BMC Pediatr 2024;24:799.39643879
8 Kiliçli Id A, Zeyneloglu Id S. Effect of reflexology on pain, fatigue, sleep quality, and lactation in postpartum primiparous women after cesarean delivery: A randomized controlled trial. J Hum Lact 2024;40:221-36.38426483
9 Sowmiya DR, Moly KT, Sourabh R, . Foot reflexology as a complementary therapy for improving lactation and alleviating post-cesarean pain: A randomized controlled study. J Bodyw Mov Ther 2026;47:273-9.42264805
10 Menekse D, Demirhan Kayacik A, Ilcioglu K. The effect of foot reflexology on postpartum comfort and breastfeeding outcomes in postpartum women: A meta-analysis study. Breastfeed Med 2025;20:441-9.40206022
11 Keçeli MN, Öztaş HG. The effects of postpartum foot massage on maternal breastfeeding success, sleep quality, and newborn stress: A randomized controlled trial. Breastfeed Med 2026;21:513-24.42337997

## Substance Identification

### Substance Name

Reflexology

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Musculoskeletal Manipulations